# Cloxacillin

CASRN: 61-72-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that cloxacillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Cloxacillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. No studies have reported milk levels after oral cloxacillin. After a single intramuscular dose of 500 mg of cloxacillin in 2 women, milk levels ranged from 0.1 to 0.3 mg/L between 1 and 6 hours after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a telephone follow-up study, 10 nursing mothers reported taking cloxacillin (dosage unspecified). Two mothers reported diarrhea in their infants. No rashes or candidiasis were reported among the exposed infants.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-sensitive Staph. aureus) Cefazolin, Cephalexin, Dicloxacillin, Floxacillin, Oxacillin, Methicillin, Nafcillin; (Methicillin-resistant Staph. aureus) Doxycycline, Linezolid, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732
2 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418

## Substance Identification

### Substance Name

Cloxacillin

### CAS Registry Number

61-72-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins